# Edrophonium

CASRN: 312-48-1

## Drug Levels and Effects

### Summary of Use during Lactation

Edrophonium is no longer marketed in the US. No information is available on the use of edrophonium during breastfeeding. However, because of its short half-life and quaternary ammonium structure, it is unlikely to be excreted into breastmilk or orally absorbed by the infant. Administering the drug just after breastfeeding and waiting 2 to 3 hours before breastfeeding again should avoid any adverse reactions in the infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Edrophonium

### CAS Registry Number

312-48-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Cholinesterase Inhibitors

Diagnostic Agents

Parasympathomimetics